# Exenatide

CASRN: 141758-74-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of exenatide during breastfeeding. Because exenatide is a large peptide molecule with a molecular weight of 4187 daltons, the amount in milk is likely to be very low and absorption is unlikely because it is probably partially destroyed in the infant’s gastrointestinal tract. It has a short half-life, which might make it a better choice among drugs in this class for nursing mothers. If exenatide is required by the mother, it is not a reason to discontinue breastfeeding. However, until more data become available, exenatide should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. Some experts recommend closely monitoring of infant growth and developmental milestones and the nutritional status of the lactating woman.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Maslin K, Shawe J, Blowers S, . Incretin-based medications in women and reproduction: A systematic scoping review and consensus guidelines for clinical practice. Obes Rev 2026:e70203.42528099

### Alternate Drugs to Consider

(Diabetes) Acarbose, Colesevelam, Glipizide, Glyburide, Insulin, Metformin, Miglitol, Semaglutide, Tirzepatide

## Substance Identification

### Substance Name

Exenatide

### CAS Registry Number

141758-74-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Incretins

Glucagon-Like Peptide-1 Agonists

GLP-1 Agonists